# Aflibercept

CASRN: 862111-32-8

## Drug Levels and Effects

### Summary of Use during Lactation

This record refers to the use of intravitreal aflibercept. Aflibercept inhibits vascular endothelial growth factor (VEGF). Aflibercept is a large protein molecule with a molecular weight of 115,000 Daltons. Aflibercept appeared in breastmilk in small amounts in only one of four days after intravitreal injection in one mother. Absorption by the infant is unlikely because it is probably partly destroyed in the infant's gastrointestinal tract and poorly absorbed orally, so systemic effects in infants are not expected.[1] Aflibercept is approved for intravitreal injection in preterm infants with retinopathy of prematurity. The risk to nursing infants appears to be low. Since VEGF is present in human milk and is thought to help in maturation of the infant’s gastrointestinal tract, concern has been raised about the maternal use of VEGF inhibitors during breastfeeding.[2] However, the typical alternative to breastmilk is infant formula, which contains no VEGF. Some sources consider ranibizumab to be preferable to aflibercept in nursing mothers because of its lower systemic exposure after intravitreal injection.[3,4]

### Drug Levels

Maternal Levels. A woman with diabetic macular edema was given intravitreal aflibercept 2 mg one week postpartum. She was not breastfeeding her infant. Milk samples were obtained before the injection and on days 1 to 4 after the injection. Aflibercept was detected only on day 4 in a concentration of 10.9 mcg/L.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A woman with diabetic macular edema was given intravitreal aflibercept 2 mg one week postpartum. She was not breastfeeding her infant. Milk samples were obtained before the injection and on days 1 to 4 after the injection. VEGF levels were reduced from 10.6 mcg/L at baseline to 4.9 mcg/L on day 1, where it remained for the next 3 days.[5]

### Alternate Drugs to Consider

(Intravitreal) Bevacizumab, Ranibizumab

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
2 Dalal PJ, Patel AL, Carle M, et al. Review of ophthalmic and breastfeeding medicine evidence: Real and theoretical risks of intravitreal anti-VEGF administration in lactating women. Retina 2020;40:2065–9.32796446
3 Avery RL, Castellarin AA, Steinle NC, et al. Systemic pharmacokinetics and pharmacodynamics of intravitreal aflibercept, bevacizumab, and ranibizumab. Retina 2017;37:1847–58.28106709
4 Banerjee M, Moharana S, Padhy SK. Systemic effects of intravitreal anti-VEGF therapy: A review of safety across organ systems. Ophthalmol Ther 2025 40478389
5 Juncal VR, Paracha Q, Bamakrid M, et al. Ranibizumab and aflibercept levels in breast milk after intravitreal injection. Ophthalmology 2020;127:278–80.31526521

## Substance Identification

### Substance Name

Aflibercept

### CAS Registry Number

862111-32-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Angiogenesis Inhibitors

Recombinant Fusion Proteins